# Betony

## Drug Levels and Effects

### Summary of Use during Lactation

Betony is the name given to a group of plants from the genus Stachys and Betonica that contain tannins and flavonoid glycosides. It has been used as a nerve tonic to treat anxiety and headaches, an astringent to treat diarrhea, and as a gargle for mouth and throat irritations. Betony is a purported galactogogue; however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[1,2] No data exist on the excretion of any components of betony into breastmilk. Because of a general lack of safety data, betony should be avoided during breastfeeding.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Older studies performed in Eastern Europe by one group of researchers claim that betony extract can increase milk supply and the protein content of breastmilk.[3-5] No modern, well-controlled studies were found as of the revision date.

### References

1 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
2 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
3 Bakhalova NV, Kharmats DA. Effect of the milk from mothers receiving methylergometrine and hedge nettle extract on the physical development of the newborn infant. Zdravookhranenie Kirgizii 1977:28-31.17972
4 Aronova BN, Stegailo EA. Effect of an extract of Betonica officinalis on lactation. Akush Ginekol (Sofia) 1977:68-9.
5 Stegailo EA, Lebedeva IM, Aronova BN, et al. Treatment of hypogalactia with an extract of the betonical hedge nettle. Akush Ginekol (Sofia) 1980:19-20.

## Substance Identification

### Substance Name

Betony

### Scientific Name

Stachys sp.

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal